# Phenobarbital

CASRN: 50-06-6

## Drug Levels and Effects

### Summary of Use during Lactation

Inter- and intrapatient variability in excretion of phenobarbital into breastmilk is extensive. Phenobarbital in breastmilk apparently can decrease withdrawal symptoms in infants who were exposed in utero, but it can also cause drowsiness in some infants, especially when used with other sedating drugs. Monitor the infant for sedation, poor feeding and poor weight gain, especially in younger, exclusively breastfed infants and when using combinations of psychotropic drugs. Sometimes breastfeeding might have to be limited or discontinued because of excessive drowsiness and poor weight gain. If there is concern, measurement of the infant's serum phenobarbital concentration might help rule out toxicity.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. In women taking phenobarbital for 3 days, average milk levels at 23 hours after the last dose were as follows: 90 mg daily in 4 women, 0.85 mg/L (range 0.8 to 1 mg/L); 150 mg daily in 2 women, 1.25 mg/L (range 1 to 1.5 mg/L); 225 mg daily in 2 women, 5.2 mg/L (range 2.7 to 5 mg/L). The same paper reported 2 women taking phenobarbital 125 mg 3 times daily along with phenytoin. Milk phenobarbital levels were fairly constant during the day, averaging from 5.6 to 6 mg/L at 6 am, 10 am and 8 pm in one woman between days 3 and 7 postpartum. In the other, milk levels averaged 7.3, 7.8 and 8.8 mg/L at 6 am, 10 am and 8 pm, respectively, between days 5 and 11 postpartum.[1]

A breastmilk phenobarbital level of 2.7 mg/L was found 16 hours after the last dose in a patient taking 30 mg 4 times daily for 3.5 days at 6 days postpartum.[2]

Eight phenobarbital breastmilk levels were measured between days 3 and 32 postpartum at unstated times after the dose in an unstated number of women who were taking phenobarbital and other anticonvulsants in unstated dosages. Phenobarbital milk levels averaged 10.4 mg/L (range 0.5 to 33 mg/L), while maternal serum levels averaged 19.3 mg/L.[3]

Phenobarbital breastmilk concentrations were determined in a group of 26 mothers with epilepsy who were taking phenobarbital alone or in combination with other anticonvulsants. Determinations were made 4 times after delivery: within 5 days postpartum, 6 to 10 days postpartum, 1 to 2 months postpartum and 3 to 5 months postpartum. Levels were obtained 2 to 3 hours after the last dose of the day. Between 13 and 18 mothers provided samples in each time period. For each mg/kg of phenobarbital that the mothers took, their breastmilk concentrations increased by about 1 to 2 mg/L with monotherapy and 1.25 to 2.5 mg/L with combination therapy. The difference between monotherapy and combination therapy was statistically significant only during the first 5 days postpartum.[4]

Milk samples were obtained during the first week postpartum from 4 mothers who were taking phenobarbital. Their dosages ranged from 30 to 150 mg daily in 3 divided doses and milk samples were obtained 2 to 3 hours after a dose. Milk concentrations ranged from 4.5 mg/L in a woman taking 30 mg daily to 7.6 mg/L in a woman taking 150 mg daily. Phenobarbital concentrations in milk were less than those in simultaneous maternal serum samples in all cases.[5] Using the values in this paper, the average weight-adjusted infant dosage was 72.5% (range 39 to 135%) of the maternal dosage.

Infant Levels. An infant whose epileptic mother was taking phenobarbital 100 mg, primidone 625 mg, phenytoin 200 mg and sulthiame 200 mg daily during pregnancy and postpartum was partially breastfed. At 17 days of age, the phenobarbital serum level was 2 mg/L. The proportion of breastfeeding was increased, and at 1 month of age, the infant's serum phenobarbital level was 12.7 mg/L. Breastfeeding continued, but by 2 months of age, the infant's serum phenobarbital concentration was 1 mg/L.[6]

Phenobarbital serum concentrations were determined in a group of infants whose mothers were taking phenobarbital alone or in combination with other anticonvulsants. Determinations were made 4 times after delivery: within 5 days postpartum, 6 to 10 days postpartum, 1 to 2 months postpartum and 3 to 5 months postpartum. Levels were obtained 2 to 3 hours after the last dose of the day. Between 14 and 18 infants provided samples in each time period. The extent of breastfeeding was not reported. For each mg/kg of phenobarbital that the mothers took, their infants' serum concentrations increased by about 2 to 5 mg/L with monotherapy and combination therapy, except during the first 5 days postpartum when an increase in serum phenobarbital concentration was about 10 mg/L for each mg/kg of the mothers' dose. The difference between monotherapy and combination therapy was statistically significant only during the first 5 days postpartum. This greater serum concentration in the early days postpartum probably reflects transplacental passage to some extent.[4]

The breastfed (extent not stated) infant of a mother who was taking phenobarbital 90 mg daily during pregnancy and postpartum had phenobarbital plasma levels measured on day 6 and 19 postpartum. On day 6, the plasma levels were 12.1 and 28.3 mg/L before and 2.5 hours after the mother's dose, respectively. On day 19, infant plasma levels had increased to 15.4 and 54.7 mg/L before and 2.5 hours after the mother's dose, respectively.[7]

### Effects in Breastfed Infants

Two 1-week-old infants whose mothers had been receiving phenobarbital 100 mg at bedtime for 3 to 5 nights exhibited deep slumber with difficulty in awakening that was possibly caused by phenobarbital in breastmilk.[8]

A mother was taking phenobarbital 390 mg daily and phenytoin 400 mg daily during pregnancy and postpartum. Her infant was drowsy at birth, refused to suck and was given partial formula feeding. At 5 days of age, her infant was admitted to the hospital pale and collapsed with bruising, bleeding, and a decreased hemoglobin, thought to be due to methemoglobinemia. Breastfeeding was discontinued and the infant was given a transfusion which rapidly improved her condition. On day 10, the mother resumed breastfeeding the infant. Within 24 hours the infant was extremely sedated and refused to suck and was fed breastmilk with a spoon. The sedation persisted for 2 days until breastmilk was discontinued permanently because of a return of methemoglobinemia. The extreme sedation was probably due to phenobarbital in the milk and the methemoglobinemia was probably caused by the phenytoin.[9]

An infant death occurred from overlying and suffocation by a parent during sleep. Sedation from phenobarbital, primidone, and phenytoin in breastmilk was possibly a contributing factor. Phenobarbital was found in the infant's serum (8 mg/L) and liver (16 mcg/g) on autopsy.[10]

Probable drug withdrawal symptoms, manifested as spontaneous tremors, occurred in a breastfed infant in the third month of life when her mother who was taking phenobarbital (dose not stated) during pregnancy and breastfeeding, abruptly discontinued nursing.[11]

A probable case of drug-induced drowsiness occurred in a newborn whose mother was taking primidone, carbamazepine and phenytoin (dosages not stated). At day 30, breastfeeding was discontinued because of the drowsiness that occurred after each feeding and poor weight gain. These authors also found that 13 partially breastfed infants whose mothers were taking anticonvulsants gained weight at a slower rate during the first 5 days postpartum than did 75 infants of epileptic mothers who bottle fed or control mothers taking no medications.[12]

A breastfed infant whose mother was taking phenobarbital 90 mg, primidone 375 mg, and carbamazepine 800 mg daily did well despite a phenobarbital saliva level of 3.4 mg/L. At 7 months of age, after the mother abruptly stop nursing, the infant had a number of "startle reactions" and infantile seizures occurred which were confirmed by an abnormal electroencephalogram. Continued phenobarbital administration to the infant for 15 months controlled the seizures and no more occurred up to 5 years of age.[13]

### Effects on Lactation and Breastmilk

No direct effect is known, but mothers taking antiepileptic drugs stop breastfeeding earlier and supplement more than mothers not taking antiepileptic drugs. Most of these reports occurred in older studies in which sedating agents such as phenobarbital and primidone were used. Infant sucking difficulties and sedation were reasons given for the reduced nursing.[12,14]

### Alternate Drugs to Consider

(Sedative) Lorazepam, Midazolam, Oxazepam; (Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Westerink D, Glerum JH. Separation and microdetermination of phenobarbital and phenytoin in human milk. Pharm Weekbl 1965;100:577-83.14343657
2 Horning MG, Stillwell WG, Nowlin J, et al. Identification and quantification of drugs and drug metabolites in human breast milk using GC-MS-COM methods. Mod Probl Paediatr 1975;15:73-9.
3 Kaneko S, Sato T, Suzuki K. The levels of anticonvulsants in breast milk. Br J Clin Pharmacol 1979;7:624-7.465285
4 Gomita Y, Furuno K, Araki Y, et al. Phenobarbital in sera of epileptic mothers and their infants. Am J Ther 1995;2:968-71.11854816
5 Shimoyama R, Ohkubo T, Sugawara K. Characteristics of interaction between barbiturate derivatives and various sorbents on liquid chromatography and determination of phenobarbital in Japanese human breast milk. J Liq Chromatogr Relat Technol 2000;23:587-99. doi:10.1081/Jlc-100101475
6 Granström ML, Bardy AH, Hiilesmaa VK. Prolonged feeding difficulties of infants of primidone mothers during neonatal period: Preliminary results from the Helsinki study. In: Janz D, Bossi L, Dam M, et al., eds. Epilepsy, pregnancy and the child. New York: Raven Press; 1982:357-8.
7 Pote M, Kulkarni R, Agarwal M. Phenobarbital toxic levels in a nursing neonate. Indian Pediatr 2004;41:963-4.15475647
8 Tyson RM, Shrader EA, Perlman HH. Drugs transmitted through breast milk, II: Barbiturates. J Pediatr 1938;13:86-90. doi:10.1016/S0022-3476(38)80132-3
9 Finch E, Lorber J. Methaemoglobinaemia in the newborn. Probably due to phenytoin excreted in human milk. J Obstet Gynaecol Br Emp 1954;61:833-4.13222209
10 Juul S. Barbiturate poisoning via breast milk? Ugeskr Laeger 1969;131:2257-8.5372729
11 Gopfert-Geyer I, Koch S, Rating D, et al. Delivery, gestation, data at birth, and neonatal period in children of epileptic mothers. In: Janz D, Bossi L, Dam M, et al., eds. Epilepsy, pregnancy and the child. New York: Raven Press; 1982:179-87.
12 Kaneko S, Suzuki K, Sato T, et al. The problems of antiepileptic medication in the neonatal period: Is breast-feeding advisable? In: Janz D, Bossi L, Dam M, et al., eds. Epilepsy, pregnancy and the child. New York: Raven Press; 1982:343-8.
13 Knott C, Reynolds F, Clayden G. Infantile spasms on weaning from breast milk containing anticonvulsants. Lancet 1987;330:272-3.2886736
14 Hartmann AM, Koch S, Jager-Roman E, et al. Breast feeding, weight gain and behaviour in newborns of epileptic women. Monatsschr Kinderheilkd 1994;142:505-12.

## Substance Identification

### Substance Name

Phenobarbital

### CAS Registry Number

50-06-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Barbiturates

Hypnotics and Sedatives

GABA Modulators